# Imiglucerase

CASRN: 143003-46-7

## Drug Levels and Effects

### Summary of Use during Lactation

Imiglucerase is a synthetic form of beta-glucocerebrosidase, which is a normal component of human milk. After therapeutic use of imiglucerase, breastmilk levels are lower than those of normal mothers.[1] Additionally, absorption by the infant is unlikely because it is probably destroyed in the infant’s gastrointestinal tract.[2,3] International panels of clinicians that treat Gaucher’s disease recommend breastfeeding with enzyme replacement therapy such as imiglucerase.[3,4] Consider limiting the duration of breastfeeding to about 6 months to avoid excessive bone loss in the nursing mother.[3–5]

### Drug Levels

Maternal Levels. A woman on long-term imiglucerase therapy for Gaucher’s disease was monitored after her usual dose of 60 units/kg intravenously every 2 weeks. At 6 months postpartum, milk samples were obtained and measured for beta-glucocerebrosidase activity, using milk from 10 mothers with galactorrhea as controls. The highest enzyme activity in milk was 16 nanomoles/hour/mL at 1 hour after the end of the infusion. Enzymatic activity decreased to the preinfusion level (0.008 nanomoles/hour/mL) in the samples of breastmilk taken about 5 hours after the end of the infusion and remained low for all samples taken over the first 24 hours after the dose. Breastmilk beta-glucocerebrosidase activity of the control subjects ranged from 0.067 to 0.214 nanomoles/hour/mL.[6]

A woman with type 1 Gaucher’s disease was exclusively breastfeeding her infant postpartum re-initiated intravenous imiglucerase 30 units/kg over 2 hours every 2 weeks at 1 month postpartum. Milk beta-glucocerebrosidase activity was measured at the time of her first postpartum dose, milk. Before the infusion activity was 2 nanomoles/hour/mL. Milk levels were 3 and 4 nanomoles/hour/mL immediately after and 30 minutes after the infusion, respectively. These values were much lower than the level of 42 nanomoles/hour/mL measured in the milk of a control mother without Gaucher’s disease.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman received imiglucerase 30 units/kg every 2 weeks during pregnancy and for 3 months while breastfeeding. The dose was then increased to 60 units/kg every 2 weeks because of disease progression, and she continued breastfeeding until the infant was 1 year old.[7]

A woman receiving long-term therapy with imiglucerase 60 units/kg intravenously every 2 weeks became pregnant twice during therapy and breastfed both infants (extent not stated). Both infants developed normally during the observation periods of 13 and 33 months.[6]

A woman with type 1 Gaucher’s disease was exclusively breastfeeding her infant postpartum re-initiated intravenous imiglucerase 30 units/kg every 2 weeks beginning at 1 month postpartum. The infant was breastfed for about 9 months postpartum and was reportedly healthy when followed up to 3 years of age.[1]

A woman with Gaucher’s disease received imiglucerase 1800 units (30 units/kg) every 2 weeks during pregnancy and postpartum. Her infant was breastfed (extent not stated) and was followed by a pediatrician who determined that development was normal over 2 years.[8]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Alglucerase, Taliglucerase Alfa

### References

1 Dornelles A, de Oliveira Netto C, Vairo F, . Breastfeeding in Gaucher disease: Is enzyme replacement therapy safe? Clin Ther 2014;36:990–1.24768190
2 Belmatoug N. Considerations for pregnant patients with Gaucher disease: Challenges for the patient and physician. Clin Ther 2009;31 (Suppl. C):S192–S3. doi:10.1016/S0149-2918(09)80019-2
3 Zimran A, Morris E, Mengel E, . The female Gaucher patient: The impact of enzyme replacement therapy around key reproductive events (menstruation, pregnancy and menopause). Blood Cells Molec Dis 2009;43:264–88.19502088
4 Calderón E, Rodríguez-Fernández A, Calderón-Baturone I, . Spanish consensus on managing pregnancy in women with Gaucher disease. Orphanet J Rare Dis 2025;20:146.40155919
5 Granovsky-Grisaru S, Belmatoug N, vom D, S, . The management of pregnancy in Gaucher disease. Eur J Obstet Gynecol Reprod Biol 2011;156:3–8.21269752
6 Sekijima Y, Ohashi T, Ohira S, . Successful pregnancy and lactation outcome in a patient with Gaucher disease receiving enzyme replacement therapy, and the subsequent distribution and excretion of imiglucerase in human breast milk. Clin Ther 2010;32:2048–52.21118740
7 Mrsic M, Fumic K, Potocki R, . Successful pregnancy of enzyme replacement therapy with Cerezyme. Clin Ther 2007;29 (Suppl C):S84. doi:10.1016/S0149-2918(07)80459-0
8 Korkmazer E, Solak N, Tokgöz V. Pregnancy and lactation in a patient with Gaucher disease receiving enzyme replacement therapy: Case report. Turk J Clin Obstet Gynecol 2015;25:224–6. doi:10.5336/gynobstet.2014-41780

## Substance Identification

### Substance Name

Imiglucerase

### CAS Registry Number

143003-46-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzymes

Enzyme Replacement Therapy